# Sodium Chromate Cr 51

CASRN: 10039-53-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of sodium chromate Cr 51 as a diagnostic agent. No information is available on the use of sodium chromate Cr 51 during breastfeeding. The manufacturer recommends withholding breastfeeding after a diagnostic dose of sodium chromate Cr 51, but does not provide a specific duration. The long biological and physical half-lives of chromium may preclude resumption of breastfeeding of the infant. Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital and when the radioactivity is at background levels they may safely resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[1]

### Drug Levels

Chromium 51 is a gamma emitter with a principal photon energy of 320 keV and a physical half-life of 27.7 days.[2] Chromate binds to red blood cells and is eliminated with a biologic half-life of 25 to 35 days.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
2 Burkhart M, Cockerham A, Cook J, et al. NUREG-1556, Volume 9, Revision 3. Consolidated guidance about materials licenses. Program-specific guidance about medical use licenses. US Nuclear Regulatory Commission Office of Nuclear Material Safety and Safeguards 2019. http://www.nrc.gov/reading-rm/doc-collections/nuregs/staff/sr1556/v9/r2/

## Substance Identification

### Substance Name

Sodium Chromate Cr 51

### CAS Registry Number

10039-53-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Chromium Radioisotopes

Diagnostic Agents